# Blessed Thistle

CASRN: 977023-13-4

## Drug Levels and Effects

### Summary of Use during Lactation

Blessed thistle (Cnicus benedictus, Carduus benedictus, Cardui benedicti) contains sesquiterpene lactones, triterpenoids, lignans, tannins, essential oils, flavonoids, and polyenes. Blessed thistle is a purported galactogogue,[1-6] and is included in some proprietary mixtures promoted to increase milk supply; however, no scientifically valid clinical trials support this use. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[7,8] Blessed thistle is "generally recognized as safe" (GRAS) as a flavoring in alcoholic beverages (e.g., Benedictine) by the U.S. Food and Drug Administration. Because it is a member of the ragweed family, allergy is a concern and high doses reportedly cause stomach cramps, nausea and vomiting. Elevated liver enzymes occurred in a woman taking Mother's Milk Tea, which contains blessed thistle and other ingredients.[9]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A small manufacturer-sponsored, double-blind, randomized study compared Mother's Milk tea (Traditional Medicinals, Sebastopol, CA) to lemon verbena tea in exclusively breastfeeding mothers with milk insufficiency. Each Mother's Milk tea bag contained 35 mg of blessed thistle herb as well as several other herbs. Mothers were instructed to drink 3 to 5 cups of tea daily. No differences were seen between groups in infant digestive, respiratory, dermatological, and other maternal-reported adverse events. No differences were seen in the growth parameters of the breastfed infants between the two groups.[10]

### Effects on Lactation and Breastmilk

In a survey of nursing mothers in Australia, 98 mothers were taking blessed thistle as a galactogogue. On average, mothers rated blessed thistle being between “slightly effective” and “moderately effective” on a Likert scale. Eight percent of mothers taking blessed thistle reported experiencing adverse reactions, most commonly nausea, stomach cramps, dry mouth and fatigue.[11]

### References

1 Howard CR, Lawrence RA. (1999). Drugs and breastfeeding. Clin Perinatol.
2 Petrie KA, Peck MR. (2000). Alternative medicine in maternity care. Prim Care.
3 Westfall RE. (2003). Galactagogue herbs: A qualitative study and review. Can J Midwifery Res Practice.
4 Low Dog T. (2009). The use of botanicals during pregnancy and lactation. Altern Ther Health Med.
5 Dennehy C, Tsourounis C, Bui L, et al. (2010). The use of herbs by California midwives. J Obstet Gynecol Neonatal Nurs.
6 Abascal K, Yarnell E. (2008). Botanical galactagogues. Altern Complement Ther.
7 Brodribb W. ABM Clinical Protocol #9. (2018). Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med.
8 (2021). Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol.
9 Silverman AL, Kumar A, Borum ML. (2018). Re: "Herbal use during breastfeeding" by Anderson (Breastfeed Med 2017;12(9):507-509). Breastfeed Med.
10 Wagner CL, Boan AD, Marzolf A, et al. (2019). The safety of Mother's Milk(R) Tea: Results of a randomized double-blind, controlled study in fully breastfeeding mothers and their infants. J Hum Lact.
11 McBride GM, Stevenson R, Zizzo G, et al. (2021). Use and experiences of galactagogues while breastfeeding among Australian women. PLoS One.

## Substance Identification

### Substance Name

Blessed Thistle

### CAS Registry Number

201530-41-8

### Scientific Name

Cnicus benedictus

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal